# Cinnarizine

CASRN: 298-57-7

## Drug Levels and Effects

### Summary of Use during Lactation

Cinnarizine is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. No information is available on the use of cinnarizine during breastfeeding. Expert opinion recommends that cinnarizine not be used in migraine prophylaxis in nursing mothers.[1-3] An alternate drug is preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Antihistamine) Cetirizine, Desloratadine, Fexofenadine, Levocetirizine, Loratadine; (Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Rimegepant, Topiramate, Valproic Acid

### References

1 Pringsheim T, Davenport WJ, Mackie G, et al. Canadian Headache Society guideline for migraine prophylaxis. Can J Neurol Sci 2012;39:S1-2.22683887
2 Negro A, Delaruelle Z, Ivanova TA, et al. Headache and pregnancy: A systematic review. J Headache Pain 2017;18:106.29052046
3 Davanzo R, Bua J, Paloni G, et al. Breastfeeding and migraine drugs. Eur J Clin Pharmacol 2014;70:1313-24.25217187

## Substance Identification

### Substance Name

Cinnarizine

### CAS Registry Number

298-57-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Calcium Channel Blockers

Histamine H1 Antagonists

Vasodilator Agents